# Lefamulin

CASRN: 1061337-51-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of lefamulin during breastfeeding. The manufacturer recommends that mothers should avoid breastfeeding during treatment and for 2 days after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Lefamulin

### CAS Registry Number

1061337-51-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Bacterial Agents

Anti-Infective Agents